# Ethosuximide

CASRN: 77-67-8

## Drug Levels and Effects

### Summary of Use during Lactation

Average ethosuximide dosages of 50 to 60% of the maternal weight-adjusted dosage are excreted in human milk and infant plasma levels of 25 to 30% of maternal levels are common. Although no adverse effects attributable solely to ethosuximide in breastmilk have been reported, monitor the infant for drowsiness, adequate weight gain, and developmental milestones, especially in younger, exclusively breastfed infants and when using combinations of anticonvulsants. Measurement of an infant serum level might help rule out toxicity if there is a concern.

### Drug Levels

In published reports of anticonvulsant use during breastfeeding, most women were taking a combination of anticonvulsants. Some other anticonvulsants (e.g., phenytoin, carbamazepine) stimulate the metabolism of other drugs including anticonvulsants, whereas others (e.g., valproic acid) inhibit the metabolism of other drugs. Therefore, the relationship of the maternal dosage to the concentration in breastmilk can be quite variable, making calculation of the weight-adjusted percentage of maternal dosage less meaningful than for other drugs in this database.

Maternal Levels. A woman with epilepsy was taking primidone 250 mg and ethosuximide 500 mg orally every 12 hours. She did not nurse her infant, but her milk flow was maintained to collect milk for study. Breastmilk ethosuximide levels were 55 to 70 mg/L on 4 occasions (times with respect to doses not stated) on days 3 to 5 postpartum.[1]

Four ethosuximide breastmilk levels were measured between days 3 and 32 postpartum at unstated times after the dose in an unstated number of women who were taking ethosuximide and other anticonvulsants in unstated dosages. Ethosuximide milk levels averaged 21.3 mg/L (range 18 to 24 mg/L), while maternal serum levels averaged 29.3 mg/L.[2]

A woman with epilepsy was taking oral ethosuximide 250 mg daily as a single agent during pregnancy and breastfeeding. Breastmilk samples were measured on several occasions during the first 4 months postpartum. Maternal serum and milk levels increased to higher levels between 1 and 2 months postpartum and then decreased, although the times of collection with respect to the doses were not reported. Milk levels on day 3 postpartum were about 31 mg/L, increased to about 55 mg/L at 1 month postpartum and decreased to about 42 mg/L at 4.5 months postpartum.[3]

Breastmilk ethosuximide levels were measured 1 to 4 times in 5 mothers who were taking ethosuximide alone (1 woman) or with other anticonvulsants (4 women). Ethosuximide milk levels averaged 49.5 mg/L (range 27 to 68.5 mg/L).[4] Using the average of the reported milk levels and maternal doses reported, exclusively breastfed infants would receive an average of 62% (range 32 to 113%) of the maternal weight-adjusted dosage.

Three women taking ethosuximide alone and one taking ethosuximide and phenytoin had colostrum levels that were 79 to 103% of maternal plasma levels; at 1.5 to 4.5 months postpartum, the average ratio was 1.[5]

A mother taking ethosuximide 1 gram daily during pregnancy and postpartum had breastmilk levels measured during the first week postpartum. The breastmilk concentration was 36 mg/L which was 92% of the maternal serum concentration.[6]

Two women with epilepsy who were taking ethosuximide had breastmilk samples measured. One mother who was taking ethosuximide 1 g daily plus carbamazepine 1.2 g daily had a breastmilk ethosuximide level of 33.9 mg/L at 2 weeks postpartum. The other mother taking ethosuximide monotherapy 750 mg daily had a milk level of 52.5 mg/L at 3.5 months postpartum.[7] Their infants would receive 35 and 57% of the maternal weight-adjusted dosage if they were exclusively breastfed.

Infant Levels. An exclusively breastfed infant whose mother was taking ethosuximide 250 mg daily began nursing (extent not stated) on day 2 postpartum and continued through 4.5 months of observation. Infant serum levels increased in parallel to maternal serum and breastmilk concentrations. The infant serum level was 22 mg/L on day 3 and reached a maximum of 29.5 mg/L at 1 month of age before decreasing to about 8.5 mg/L at 4.5 months of age. Intensive sampling of infant serum levels at 4 and 4.5 months of age found little fluctuation during the day and infant plasma levels were 24 to 30% of simultaneous maternal serum levels on the 2 days.[3]

Three fully breastfed infants whose mothers were taking ethosuximide had plasma levels that were 24 to 75% of their mother's average plasma levels. A fourth infant who was mostly formula-fed had undetectable plasma levels.[5]

The breastfed infant of a mother taking ethosuximide monotherapy 750 mg daily had a serum level of 16.9 mg/L which was 32% of the simultaneous maternal plasma level.[7]

### Effects in Breastfed Infants

An infant whose mother was taking ethosuximide 250 mg daily began exclusive breastfeeding on day 2 postpartum and continued through 4.5 months of observation. The infant developed normally during this time and had no signs of an adverse reaction.[3]

Sedation, poor sucking and poor weight gain during the first 4 weeks of life occurred in a breastfed newborn whose mother was taking ethosuximide.[4] The reaction was possibly caused by ethosuximide in breastmilk; however, the mother was also taking primidone and valproic acid.

Three fully breastfed infants and a mostly formula-fed whose mothers were taking ethosuximide had no adverse reactions observed during the first 1.5 to 4.5 months of life.[5]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

(Seizure Disorder) Carbamazepine, Divalproex, Gabapentin, Lamotrigine, Oxcarbazepine, Phenytoin, Valproic Acid

### References

1 Koup JR, Rose JQ, Cohen ME. Ethosuximide pharmacokinetics in a pregnant patient and her newborn. Epilepsia 1978;19:535-9.104867
2 Kaneko S, Sato T, Suzuki K. The levels of anticonvulsants in breast milk. Br J Clin Pharmacol 1979;7:624-7.465285
3 Rane A, Tunell R. Ethosuximide in human milk and in plasma of a mother and her nursed infant. Br J Clin Pharmacol 1981;12:855-8.7340887
4 Kuhnz W, Koch S, Jacob S, et al. Ethosuximide in epileptic women during pregnancy and lactation period. Placental transfer, serum concentration in nursed infants. Br J Clin Pharmacol 1984;18:671-7.6508976
5 Söderman P, Rane A. Ethosuximide and nursing. Acta Pharmacol Toxicol (Copenh) 1986;59 (Suppl 5 Pt 2).
6 Meyer FP, Quednow B, Potrafki A, et al. The perinatal pharmacokinetics of anticonvulsant drugs. Zentralbl Gynakol 1988;110:1195-205.3239295
7 Tomson T, Villen T. Ethosuximide enantiomers in pregnancy and lactation. Ther Drug Monit 1994;16:621-3.7878705

## Substance Identification

### Substance Name

Ethosuximide

### CAS Registry Number

77-67-8

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anticonvulsants